# Finerenone

CASRN: 1050477-31-0

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of finerenone during breastfeeding. Finerenone is 92% bound to plasma proteins, so amounts in milk are likely to be low. However, the manufacturer recommends avoiding breastfeeding during treatment and for 1 day after treatment.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Eplerenone, Spironlactone

## Substance Identification

### Substance Name

Finerenone

### CAS Registry Number

1050477-31-0

### Drug Class

Breast Feeding

Lactation

Mineralocorticoid Receptor Antagonists